# Mangafodipir

CASRN: 155319-91-8

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Mangafodipir is a chelate of manganese that releases free manganese ions into the bloodstream after it is metabolized. Because there is no published experience with mangafodipir during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferumoxides, Gadopentetate

## Substance Identification

### Substance Name

Mangafodipir

### CAS Registry Number

155319-91-8

### Drug Class

- Breast Feeding
- Lactation
- Contrast Media
- Diagnostic Agents